# Nalbuphine

CASRN: 20594-83-6

## Drug Levels and Effects

### Summary of Use during Lactation

Nalbuphine is excreted into breastmilk in amounts much smaller than the dose given to infants for analgesia. Because nalbuphine has poor oral absorption, it is unlikely to adversely affect the breastfed infant. If nalbuphine is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake to 2 to 3 days with close infant monitoring. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

In adults, nalbuphine has very poor oral bioavailability and is metabolized to inactive metabolites. Parenteral doses of 75 to 300 mcg/kg are used in infant and children. Nalbuphine sebecate is a nalbuphine prodrug that undergoes a prolonged release into the bloodstream where it is rapidly converted into nalbuphine.

Maternal Levels. Seven women who were 3 to 7 days postpartum received a single 20 mg IM dose of nalbuphine. Milk samples were collected several times, beginning at 1 hour and finishing at 24 hours after the dose. The half-life of elimination from milk was about 8 hours. A reported peak milk level in one mother was about 25 mcg/L, and it occurred 1 hour after the dose. The average milk level over the 24 hour study period in all 7 mothers was about 5 mcg/L (range 1.5 to 20 mcg/L).[1] Using the peak level reported in this study, an exclusively breastfed infant would receive a dosage of 3.7 mcg/kg daily, equivalent to 1.1% of the maternal weight-adjusted dosage. Using the average milk level from this study, an exclusively breastfed infant would ingest 0.75 mcg/kg daily, equivalent to 0.2% of the maternal weight-adjusted dosage or 0.25 to 1% of the infant parenteral dosage.

Eighteen women were administered nalbuphine 0.2 mg/kg intravenously every 4 hours (average 25.5 mcg/kg daily) for pain following cesarean section. Milk samples were collected every 3 hours during the second day of drug administration. Because of small milk volumes, only 32 samples from 14 of the women were collected. The average milk nalbuphine concentration was 42 mcg/L, and the average maximum milk concentration was 61 mcg/L. The authors estimated that a fully breastfed infant would receive an average of 7 mcg/kg daily which amounts to about 0.6% of the weight-adjusted maternal dosage.[2]

Sixteen women who had undergone a cesarean section were administered one dose of 150 mg of nalbuphine sebecate intramuscularly and pooled milk samples were collected from each breast every 12 hours for 5 days. Dinalbuphine sebecate was undetectable (<0.1 mcg/L) in all samples. Of 73 milk samples collected, 52 had detectable nalbuphine (>0.1 mcg/L ) concentrations. Most of the milk samples were collected between 48 and 108 hours after dinalbuphine sebacate administration and were less than 3 mL. The geometric mean peak nalbuphine concentration was 12.7 mcg/L at 77 hours after the dose. The median peak concentration was 9.3 mcg/L at 66 hours after the dose. The geometric mean nalbuphine concentration was 10.6 mcg/L. The mean measured daily infant dose of nalbuphine calculated by multiplying the concentration times the milk volume at each collection was 7.5 ng/kg with a median value of 8 ng/kg.[3]

### Effects in Breastfed Infants

A study compared pain control in women give, morphine sulfate by intravenous patient-controlled analgesia (PCA) following cesarean section or a single dose of intramuscular dinalbuphine sebecate 150 mg followed by PCA with morphine sulfate. All women were also given mefenamic acid 500 mg four times daily and propacetamol as needed. The dinalbuphine group used a lower amount of morphine by PCA, although the difference was not statistically significant, and a significantly lower amount of propacetamol. No instances of respiratory suppression, urinary retention, constipation, vomiting, or skin rash were observed after breastfeeding in either group.[4]

### Effects on Lactation and Breastmilk

Nalbuphine can increase serum prolactin.[5] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A study compared women who received nalbuphine or butorphanol during labor (n = 26) to those who received no analgesia (n = 22). The time to effective breastfeeding was longer (46.5 minutes) in the analgesia group than in the no analgesia group (35.4 minutes).[6]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[7]

A study compared pain control in women give, morphine sulfate by intravenous patient-controlled analgesia (PCA) following cesarean section or a single dose of intramuscular dinalbuphine sebecate 150 mg followed by PCA with morphine sulfate. All women were also given mefenamic acid 500 mg four times daily and propacetamol as needed. Within 4 days of the procedure, 67% of morphine-only and 72% of participants in the dinalbuphine sebecate group gave breastmilk, 17 (52%) participants in morphine-only and 20 (63%) in dinalbuphine group breastfed at least once during the assessment period, and 15% in the morphine-only and 9% in dinalbuphine group gave pumped breast milk via a baby bottle only. The time between cesarean section and feeding via a baby bottle or breastfeeding was shorter in the group who received dinalbuphine, 1 day vs 1.7 days.[4]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Wischnik A, Wetzelsberger N, Lucker PW. Elimination of nalbuphine in human milk. Arzneimittelforschung 1988;38:1496–8.3196391
2 Jacqz-Aigrain E, Serreau R, Boissinot C, et al. Excretion of ketoprofen and nalbuphine in human milk during treatment of maternal pain after delivery. Ther Drug Monit 2007;29:815–8.18043481
3 Tang SL, Wang KY, Hsiao WK, et al. Breast milk excretion of dinalbuphine sebacate injection administered after cesarean section. J Clin Pharmacol 2024;64:755–61.38425290
4 Hou PH, Chung SM, Huang JY, et al. Efficacy and safety of extended-release dinalbuphine sebacate in a multimodal analgesic regimen following cesarean section: A prospective observational study. Taiwan J Obstet Gynecol 2026;65:539–45.42036188
5 Saarialho-Kere U. Psychomotor, respiratory and neuroendocrinological effects of nalbuphine and haloperidol, alone and in combination, in healthy subjects. Br J Clin Pharmacol 1988;26:79–87.3060191
6 Crowell MK, Hill PD, Humenick SS. Relationship between obstetric analgesia and time of effective breast feeding. J Nurse Midwifery 1994;39:150–6.7931694
7 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167–73.24451212

## Substance Identification

### Substance Name

Nalbuphine

### CAS Registry Number

20594-83-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Narcotic Antagonists